# Doravirine

CASRN: 1338225-97-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of doravirine during breastfeeding. However, amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. No information is available on the excretion of islatravir, which is present in Idvynso, into breastmilk. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

### Drug Levels

Maternal Levels. In a study of a new analytic technique, one healthy lactating volunteer took a single 100 mg dose of doravirine. A peak milk concentration of about 0.42 mg/L occurred at about 2 hours after the dose. By 24 hours after the dose, the milk concentration was about 0.05 mg/L.[3]

Eight lactating women were given a single oral dose of 100 mg of doravirine was administered, with plasma samples collected at 0, 1, 2, 3, 4, 5, 6, 8, 10, 12, 24 hours after the dose. Breastmilk samples were collected with an electric breast pump, emptying both breasts, at 0, 2, 4, 6, 12, 24 hours after the dose. A median peak milk concentration of 0.31 mg/L occurred at a mean of 11.56 hours after the dose. The authors reported an RID of 0.86%, based on the actual milk volumes reported by the study participants. Based on the reported AUC value and standard daily milk volume of 150 mL/kg , the median milk concentrations was 0.22 mg/L resulting in a median daily dosage of 0.033 mg/kg. This dose resulted in a relative infant dose of 2.7%. The authors went on to create a PBPK model that predicted these values relatively well, with an RID of 1.9%.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Gynecomastia has been reported among men receiving highly active antiretroviral therapy. Gynecomastia is unilateral initially, but progresses to bilateral in about half of cases. No alterations in serum prolactin were noted and spontaneous resolution usually occurred within one year, even with continuation of the regimen.[5-7] Some case reports and in vitro studies have suggested that protease inhibitors might cause hyperprolactinemia and galactorrhea in some male patients,[8,9] although this has been disputed.[10] The relevance of these findings to nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 van der Wekken-Pas LC, van Ewijk Beneken Kolmer EWJ, te Brake LHM, et al. Quantification of dolutegravir, bictegravir, raltegravir and doravirine in human breastmilk with UPLC-MS/MS. J Chromatogr B Analyt Technol Biomed Life Sci 2025;1264:124739.40712298
4 van der Wekken-Pas L, Burger D, Greupink R, et al. Physiologically based pharmacokinetic model combined with a clinical lactation study to determine doravirine concentrations in human breastmilk. Br J Clin Pharmacol 2025;92:952–9.41199575
5 García-Benayas T, Blanco F, Martin-Carbonero L, et al. Gynecomastia in HIV-infected patients receiving antiretroviral therapy. AIDS Res Hum Retroviruses 2003;19:739–41.14585204
6 Pantanowitz L, Evans D, Gross PD, et al. HIV-related gynecomastia. Breast J 2003;9:131–2.12603389
7 Evans DL, Pantanowitz L, Dezube BJ, et al. Breast enlargement in 13 men who were seropositive for human immunodeficiency virus. Clin Infect Dis 2002;35:1113–9.12384846
8 Hutchinson J, Murphy M, Harries R, et al. Galactorrhoea and hyperprolactinaemia associated with protease-inhibitors. Lancet 2000;356:1003–4.11041407
9 Orlando G, Brunetti L, Vacca M. Ritonavir and saquinavir directly stimulate anterior pituitary prolactin secretion, in vitro. Int J Immunopathol Pharmacol 2002;15:65–8.12593790
10 Montero A, Bottasso OA, Luraghi MR, et al. Galactorrhoea, hyperprolactinaemia, and protease inhibitors. Lancet 2001;357:473–5.11273087

## Substance Identification

### Substance Name

Doravirine

### CAS Registry Number

1338225-97-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors